# Nitric Oxide

CASRN: 10102-43-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on breastfeeding during the therapeutic use of nitric oxide by inhalation. Nitric oxide has a half-life of only a few seconds, so exogenously administered nitric oxide cannot reach the breastmilk. Nitric oxide is metabolized to methemoglobin and nitrate, which are present in the maternal systemic circulation. Although maternal nitrate serum levels may be elevated during nitric oxide administration,[1-3] this does not result in elevated breastmilk nitrate levels.[4,5] Both nitric oxide and nitrate are normal components of human milk,[6-8] and nitric oxide is administered directly to newborns by inhalation to treat respiratory failure. Given the above, it appears to be acceptable to breastfeed during maternal nitric oxide inhalation therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Nitric oxide produced locally in the breast may have a role in the letdown reflex at the initiation of lactation. It results in high concentrations of nitrates and nitrites in breastmilk just prior to an increase in milk production.[9] Nitric oxide may also be involved with nipple erection.[10]

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Sildenafil, Treprostinil

### References

1 Valvini EM, Young JD. Serum nitrogen oxides during nitric oxide inhalation. Br J Anaesth 1995;74:338-9.7718385
2 Preiser JC, De Backer D, Debelle F, et al. The metabolic fate of long-term inhaled nitric oxide. J Crit Care 1998;13:97-103.9758023
3 Kostler WJ, Rabitsch W, Locker GJ, et al. Influence of inhaled nitric oxide on plasma nitrate concentrations in patients with adult respiratory distress syndrome and sepsis: Results of a pilot study. J Clin Anesth 2006;18:179-84.16731319
4 Green LC, Tannenbaum SR, Fox JG. Nitrate in human and canine milk. N Engl J Med 1982;306:1367.7070470
5 Greer FR, Shannon M, American Academy, of, Pediatrics, Committee, on, Nutrition, et al. Infant methemoglobinemia: The role of dietary nitrate in food and water. Pediatrics 2005;116:784-6.16140723
6 Berens P, Bryan NS. Nitrite and nitrate in human breast milk: Implications for development. In, Bryan NS, Loscalzo J, eds. Nitrite and nitrate in human health and disease. New York. Humana Press. 2017:139-53. https://link.springer.com/chapter/10.1007%2F978-3-319-46189-2_11.
7 Hord NG, Ghannam JS, Garg HK, et al. Nitrate and nitrite content of human, formula, bovine, and soy milks: Implications for dietary nitrite and nitrate recommendations. Breastfeed Med 2011;6:393-9.20958096
8 Akcay F, Aksoy H, Memisogullari R. Effect of breast-feeding on concentration of nitric oxide in breast milk. Ann Clin Biochem 2002;39:68-9.11853194
9 Iizuka T, Sasaki M, Oishi K, et al. Nitric oxide may trigger lactation in humans. J Pediatr 1998;131:839-43.9427887
10 Tezer M, Ozluk Y, Sanli O, et al. Nitric oxide may mediate nipple erection. J Androl 2012;33:805-10.22207705

## Substance Identification

### Substance Name

Nitric Oxide

### CAS Registry Number

10102-43-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Antihypertensive Agents

Antioxidants

Autonomic Agents

Bronchodilator Agents

Cardiovascular Agents

Endothelium-Dependent Relaxing Factors

Free Radical Scavengers

Neurotransmitter Agents

Peripheral Nervous System Agents

Respiratory System Agents

Vasodilator Agents